# Sugammadex

CASRN: 343306-71-8

## Drug Levels and Effects

### Summary of Use during Lactation

Negligible amounts of sugammadex are excreted into breastmilk after usual doses. Because sugammadex is a large, highly polar molecule with a molecular weight of 2002 Da, oral absorption by the infant is unlikely. Sugammadex is acceptable to use during breastfeeding.[1-3]

### Drug Levels

Maternal Levels. Women undergoing cesarean section who received general anesthesia and neuromuscular block with rocuronium donated breastmilk samples at one (n = 8) and six (n = 8) hours following sugammadex administration in a median dose of 2.56 mg/kg. All patients received a 200 mg dose, and one received an additional 200 mg dose in the PACU. Of the eight 1-hour samples, sugammadex was undetectable in seven breastmilk samples and unquantifiable (<1 mg/L) in one sample. Of the eight samples obtained at 6 hours, sugammadex was undetectable in seven breastmilk samples and unquantifiable (<1 mg/L) in one (12.5%) sample.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A study compared sugammadex to neostigmine in their effects on lactation-related hormones in women undergoing cesarean section surgery under general anesthesia. Both groups showed significant decreases in progesterone and estradiol levels after surgery compared to preoperative values; however, the sugammadex group exhibited a significantly greater decrease. Aldosterone levels reached their highest point at the end of surgery, but by 4 hours later they were lower than before surgery, especially in the sugammadex group. Cortisol showed a temporary postoperative elevation, whereas prolactin and oxytocin levels rose in both groups, with no significant intergroup variations.[5]

### Alternate Drugs to Consider

Neostigmine

### References

1 Reece-Stremtan S, Campos M, Kokajko L, et al. ABM Clinical Protocol #15: Analgesia and anesthesia for the breastfeeding mother, revised 2017. Breastfeed Med 2017;12:500–6.29624435
2 Richardson MG, Raymond BL. Sugammadex administration in pregnant women and in women of reproductive potential: A narrative review. Anesth Analg 2020;130:1628–37.31283616
3 Hirsch JG, Chia PA, Jahr JS. Sugammadex: A review of the considerations for women of childbearing age. Am J Ther 2023;30:e146–e50.36892560
4 Hodge AT, Tognolini AR, Liu X, et al. Plasma levels and postpartum breastmilk concentrations of sugammadex: A pharmacokinetic study in women undergoing general anaesthesia for caesarean delivery. Int J Obstet Anesth 2026;66:104874.41747364
5 Akça Ş, Karayol Akın A, Özdemir F, et al. Effects of sugammadex and neostigmine on maternal steroid and lactation-related hormone levels during cesarean section: A randomized clinical trial. J Clin Pract Res 2025;47:615–21. doi:10.14744/cpr.2025.59421

## Substance Identification

### Substance Name

Sugammadex

### CAS Registry Number

343306-71-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidotes

Gamma-Cyclodextrins

Neuromuscular Blockade